# Nisoldipine

CASRN: 63675-72-9

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of nisoldipine during breastfeeding, an alternate drug may be preferred.

### Drug Levels

Maternal Levels.Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Nifedipine, Nitrendipine

## Substance Identification

### Substance Name

Nisoldipine

### CAS Registry Number

63675-72-9

### Drug Class

- Breast Feeding
- Lactation
- Antihypertensive Agents
- Calcium Channel Blockers
- Vasodilator Agents